# Marstacimab

CASRN: 1985638-39-8

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the clinical use of marstacimab during breastfeeding. Because marstacimab is a large protein molecule with a molecular weight of 146,000 Da, the amount in milk is likely to be very low. It is also likely to be partially destroyed in the infant's gastrointestinal tract and absorption by the infant is probably minimal. Until more data become available, marstacimab should be used with caution during breastfeeding, especially while nursing a newborn or preterm infant. Waiting for at least 2 weeks postpartum to resume therapy may minimize transfer to the infant.[1]

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Krysko KM, Dobson R, Alroughani R, et al. Family planning considerations in people with multiple sclerosis. Lancet Neurol 2023;22:350-66.36931808

## Substance Identification

### Substance Name

Marstacimab

### CAS Registry Number

1985638-39-8

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antibodies, Monoclonal, Humanized